# Basil

CASRN: 8015-73-4

## Drug Levels and Effects

### Summary of Use during Lactation

Basil (Ocimum basilicum) contains linalool, 1,8 cineole (eucalyptol), methylchavicol, methylcinnamate and an essential oil with high estragole content. Estragole might be a procarcinogen. Basil is a purported galactogogue[1–3] but has also been used to decrease breastmilk oversupply in Persian traditional medicine.[4] No scientifically valid clinical trials support either of these uses. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[5,6] No data exist on the excretion of any components of basil into breastmilk or on the safety and efficacy of basil in nursing mothers or infants. Basil is “generally recognized as safe” (GRAS) as a food by the U.S. Food and Drug Administration. Basil appears to be safe during breastfeeding in the amounts found in foods, but many sources recommend that medicinal doses of basil not be used during lactation because of its estragole content and lack of safety information.[7]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Twelve nursing mothers who were19 weeks to 19 months postpartum ingested 100 mg of 1,8 cineole (eucalyptol) in the form of delayed-release capsules (Soledum-Klosterfrau Vertriebs GmbH, Germany) that release the drug in the intestine. Then they pumped 1 to 4 milk samples at the time they perceived the smell of eucalyptus on their breath which had been previously shown to be approximately concurrent. A total of 21 milk samples were obtained. Odor was rated by a panel of 3 to 5 experts as either smelling like eucalyptus or not. Fourteen of the samples had a distinct eucalyptus-like odor. Chemical analysis of the positive odor tests found 1,8-cineole in concentrations from 70 to about 2090 mcg/kg of milk, most in the range of 100 to 500 mcg/kg of milk. Samples with negative odor tests contained concentrations in the range of 0.98 to about 20.23 mcg/kg of milk. In one woman who donated 3 samples, the highest concentration of 71 mcg/kg occurred at 1.5 hours after ingestion, with concentrations of 1 mcg/kg before ingestion and 15 mcg/kg at 9.5 hours after ingestion.[8]

Eight women had their milk analyzed for 1,8-cineole metabolites. Ten metabolites and several enantiomers of these metabolites were detected.[9,10]

Eighteen nursing mothers who were nursing their infants of 8 to 53 weeks of age were served a curry dish that contained an average of 34.6 mg of linalool. Baseline linalool concentrations in milk averaged 0.22 mcg/L (range 0 to 1.1 mcg/L). Milk samples contained linalool in concentrations of 0.12 to 15.24 mcg/L at 1 hour after eating, 0.03 to 6.44 mcg/L at 2 hours after eating and 0.01 to 3.73 mcg/L at 3 hours after eating. In the same study, the curry dish contained an average of 394 mcg of 1,8-cineole. Baseline 1,8-cineole concentrations in milk averaged 1.44 mcg/L (range 0.07 to 7.57 mcg/L). Milk samples contained 1,8-cineole in concentrations of 0.19 to 7.41 mcg/L at 1 hour after eating, 0.33 to 7.86 mcg/L at 2 hours after eating and 0.22 to 3.33 mcg/L at 3 hours after eating.[11]

Twenty nursing mothers who were nursing their infants with a mean of 25 weeks of age were served a standardized curry dish that contained an average of 400 mcg of 1,8-cineole and 35 mg of linalool. Mothers donated one milk sample each before and 1, 2, 3, 4, 5, 6, and 8 h after the eating the curry dish. 1,8-Cineole reached its maximum concentration in milk after 1 hour in three participants, after 2 hours in four participants, after 3 hours in three participants, after 4 hours in three participants after 5 hours in three participants, after 6 hours in three participants and after 8 hours in one participant. Peak milk 1,8-cineole concentrations ranged from 0.98 to 10.1 mcg/L. Linalool reached its maximum concentration in milk after 1 hour in eleven participants, after 2 hours in six, after 3 hours in two participants, while in one participant, the maximum was not clearly determinable. Peak milk linalool concentrations ranged from 4.13 to 18.91 mcg/L. Linalool concentrations averaged 40% higher after milk samples were treated with beta-glucuronidase, indicating transfer of conjugated linalool into milk.[12]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Nursing mothers who were participating in an experiment on the excretion of 1,8-cineole (eucalyptol) in breastmilk took a 100 mg capsule of 1,8-cineole orally. Although instructed not to, 12 mothers breastfed their infants during the experiment. Mothers reported that none of their infants refused their milk or breastfed less than usual. Two mothers felt that their infants were more agitated a few hours after breastfeeding. A third mother reported that the infant stopped nursing from time to time and “looked puzzled”, but resumed nursing. Upon repeating the experiment 6 weeks later, the infant did not react in an unusual way during breastfeeding.[8]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Winterfeld U, Meyer Y, Panchaud A, . Management of deficient lactation in Switzerland and Canada: A survey of midwives’ current practices. Breastfeed Med 2012;7:317–8.22224508
2 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
3 Brahmi F, Kampemba Mujinga F, Guendouze N, . Benefits of traditional medicinal plants to African women’s health: An overview of the literature. Diseases 2025;13:160.40422592
4 Kabiri M, Kamalinejad M, Sohrabvand F, . Management of breast milk oversupply in traditional Persian medicine. J Evid Based Complementary Altern Med 2017;22:1044–50.28817945
5 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
6 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
7 Kopec K. Herbal medications and breastfeeding. J Hum Lact 1999;15:157–61.10578793
8 Kirsch F, Beauchamp J, Buettner A. Time-dependent aroma changes in breast milk after oral intake of a pharmacological preparation containing 1,8-cineole. Clin Nutr 2012;31:682–92.22405404
9 Kirsch F, Buettner A. Characterisation of the metabolites of 1,8-cineole transferred into human milk: Concentrations and ratio of enantiomers. Metabolites 2013;3:47–71.24957890
10 Kirsch F, Horst K, Rohrig W, . Tracing metabolite profiles in human milk: Studies on the odorant 1,8-cineole transferred into breast milk after oral intake. Metabolomics 2013;3:47–71. doi:10.1007/s11306-012-0466-9
11 Debong MW, N’Diaye K, Owsienko D, . Dietary linalool is transferred into the milk of nursing mothers. Mol Nutr Food Res 2021;65:e2100507.34658145
12 Debong MW, Homm I, Gigl M, . Curry-odorants and their metabolites transfer into human milk and urine. Mol Nutr Food Res 2024;68:e2300831.38602198

## Substance Identification

### Substance Name

Basil

### Scientific Name

Ocimum basilicum

### CAS Registry Number

8015-73-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal